# Chloroquine

CASRN: 54-05-7

## Drug Levels and Effects

### Summary of Use during Lactation

Only small amounts of chloroquine are excreted in breast milk; when given once weekly, the amount of drug is not sufficient to harm the infant nor is the quantity sufficient to protect the child from malaria. United Kingdom malaria treatment guidelines recommend that weekly chloroquine 500 mg be given until breastfeeding is completed and primaquine can be given.[1] Breastfeeding infants should receive the recommended dosages of chloroquine for malaria prophylaxis.[2] In HIV-infected women, elevated viral HIV loads in milk were decreased after treatment with chloroquine to a greater extent than other women who were treated with the combination of sulfadoxine and pyrimethamine.[3] Because no information is available on the daily use of chloroquine during breastfeeding, hydroxychloroquine or another agent may be preferred in this situation, especially while nursing a newborn or preterm infant.

### Drug Levels

Chloroquine has a serum half-life of over a month. Some studies have sampled milk after only a few doses before steady state was reached, making interpretation of some of the data difficult. The active metabolite, desethylchloroquine, has been measured in only a few studies.

Maternal Levels. Milk chloroquine levels were measured in one mother after an oral regimen of 600 mg daily of chloroquine base for 2 days, followed by 300 mg daily for 3 days. Average milk levels of 1.2 mg/L (range 0.2 to 2.8 mg/L) were detected in 17 random samples during, and 4 days following the doses. Metabolite levels averaged 0.68 mg/L (range 0.1 to 1.5 mg/L).[4]

In 9 women given a total dose of 25 mg/kg of chloroquine base over 3 days (10, 10 and 5 mg/kg) for malaria treatment, up to 8 breastmilk samples were obtained over the following 28 days. Chloroquine was still detectable in milk 28 days after the last dose.[5]

Three women were given a single dose of chloroquine base 600 mg orally 2 to 5 days postpartum. Milk samples were obtained periodically for about 9 days after the dose and area-under-the-curve values were calculated; milk levels were not reported. Assuming a daily intake of 1 L of milk, the authors calculated that the 3 infants would receive 0.4, 0.58 and 0.76 mg in milk over the study period. These values equate to an average of 3.1% of the maternal weight-adjusted dosage.[6]

After a single 5 mg/kg intramuscular dose of chloroquine phosphate in 6 women who were 17 days postpartum, milk chloroquine levels averaged 227 mg/L (range 192 to 319 mg/L) 2 hours after the dose. No other milk levels were obtained.[7]

Six women who were 2 to 2.5 months postpartum were given a single dose of 300 mg of chloroquine base orally. The peak chloroquine level in milk averaging 3.97 mg/L occurred 3 hours after the dose. The elimination half-life from milk averaged 132 hours. The authors estimated that an exclusively breastfed infant would receive 0.55% of the mother’s total (nonweight-adjusted) dose in 24 hours.[8]

Eleven women were given 600 mg of chloroquine base orally. The peak chloroquine plus desethylchloroquine in milk averaging 4.4 mg/L occurred an average of 14.4 hours after the dose. Chloroquine and desethylchloroquine were detected in the urine of the 4 infants who were tested. Using the peak milk concentration, the authors estimated that an exclusively breastfed infant would receive a maximum of 14% of the maternal weight-adjusted dosage. The elimination half-life from milk averaged 8.8 days.[9]

Ten women who were taking oral chloroquine 300 mg/week of chloroquine during pregnancy were changed to a dose of 100 mg daily for the last 10 days of pregnancy and first 10 days postpartum. Milk samples were taken daily for 3 days during the first 10 days postpartum at the end of nursing (time after dose unspecified). The median whole milk concentration was 352 mcg/L. The milk was separated into cell-rich and cell-poor fractions. The cell-rich fraction had a median chloroquine concentration of 746 mcg/L and colostrum cells had a calculated concentration of 81 mg/L. The authors hypothesized that the high concentration of chloroquine in the milk cells might protect the infants against HIV transmission.[10]

The passage of chloroquine and desethylchloroquine into breastmilk was measured in 16 women who received 750 mg of chloroquine phosphate (equivalent to 465 mg base) daily for 3 consecutive days starting on the day of delivery for malaria prophylaxis. Fore- and hindmilk samples were obtained on postpartum days 3, 4, 5, 10 and 18 to 22. Concentrations of the drug and metabolite varied widely among the patients with average milk concentrations of 226 mcg/L (range 44 to 336 mcg/L) and 97 mcg/L (range 26 to 175 mcg/L), respectively. The average infant dosages were 34 mcg/kg daily (range 7 to 50 mcg/kg daily) for chloroquine and 97 mcg/kg daily (range 26 to 175 mcg/kg daily) for desethylchloroquine, which would be too low to provide effective malaria prophylaxis for the breastfed infant. An exclusively breastfed infant would receive average maternal weight-adjusted dosages of 2.3% of chloroquine and 1% of its active metabolite.[11]

A physiologically based pharmacokinetic model has been developed that adequately predicts chloroquine excretion into breastmilk.[12]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Several authors have pointed out that malaria prophylaxis in nursing mothers with chloroquine is common in endemic areas.[7–9] As of the revision date, no reports of adverse reactions in breastfed infants have been published.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Auranofin, Etanercept, Gold Sodium Thiomalate, Hydroxychloroquine, Infliximab, Methotrexate, Penicillamine, Sulfasalazine; (Malaria) Atovaquone and Proguanil, Doxycycline, Mefloquine

### References

1 Lalloo DG, Shingadia D, Bell DJ, . UK Malaria Treatment Guidelines 2016. J Infect 2016;72:635–49.26880088
2 Malaria. In: Centers for Disease Control and Prevention. CDC Yellow Book 2026: Health Information for International Travel. 2026. https://www.cdc.gov/yellow-book/hcp/travel-associated-infections-diseases/malaria.html#treatment
3 Semrau K, Kuhn L, Kasonde P, . Impact of chloroquine on viral load in breast milk. Trop Med Int Health 2006;11:800–3.16772000
4 Deturmeny E, Viala A, Durand A, . Chloroquine transfer to milk. A case. Therapie 1984;39:438–40.6484889
5 Witte AM, Klever HJH, Brabin BJ, . Field evaluation of the use of an ELISA to detect chloroquine and its metabolites in blood, urine and breast-milk. Trans R Soc Trop Med Hyg 1990;84:521–5.2091344
6 Edstein MD, Veenendaal JR, Newman K, . Excretion of chloroquine, dapsone and pyrimethamine in human milk. Br J Clin Pharmacol 1986;22:733–5.3567020
7 Akintonwa A, Gbajumo SA, Biola Mabadeje, AF. Placental and milk transfer of chloroquine in humans. Ther Drug Monit 1988;10:147–9.3381230
8 Ette EI, Essien EE, Ogonor JI, . Chloroquine in human milk. J Clin Pharmacol 1987;27:499–502.3655001
9 Ogunbona FA, Onyeji CO, Bolaji OO, . Excretion of chloroquine and desethylchloroquine in human milk. Br J Clin Pharmacol 1987;23:473–6.3580253
10 Boelaert JR, Yaro S, Augustijns P, . Chloroquine accumulates in breast-milk cells: Potential impact in the prophylaxis of postnatal mother-to-child transmission of HIV-1. AIDS 2001;15:2205–7.11684948
11 Law I, Ilett KF, Hackett LP, . Transfer of chloroquine and desethylchloroquine across the placenta and into milk in Melanesian mothers. Br J Clin Pharmacol 2008;65:674–9.18279478
12 Almond LM, Abduljalil K, Pansari A, . PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940

## Substance Identification

### Substance Name

Chloroquine

### CAS Registry Number

54-05-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antirheumatic Agents

Antiprotozoal Agents